# Chelonitoxin Poisoning

## Drug Levels and Effects

### Summary of Use during Lactation

Chelonitoxism is caused by eating sea turtle meat contaminated with chelonitoxins, which are thought to accumulate from the environment without affecting the turtle. Initially, gastrointestinal symptoms occur, followed by neurologic, hepatic and renal toxicity. Breastfed infants have been adversely affected by maternal poisoning, including some deaths. Mothers suspected of having chelonitoxin poisoning should not breastfeed until they have recovered.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One poisoning incident occurred after ingestion of hawksbill turtle, Eretmochelys imbricata, at a family gathering on a remote island in Micronesia. Two adults and 4 children aged 2 to 4 years died from the poisoning before reaching the hospital. Two of the four infants who died were breastfed after maternal ingestion, one had received only breastmilk and another who had also been given a small amount of turtle meat.[1]

Another cluster of poisonings from eating meat from the same species of sea turtle occurred in western Madagascar and affected 76 victims. Seven lactating women and their 7 infants were poisoned. None of the mothers died, but 4 of the infants died, including 1 who was exclusively breastfed. Infant symptoms consisted of hypotonia, dyspnea and coma. Five of the mothers had discontinued nursing their infants because of symptoms, but 2 of their infants died despite this precaution. There are several other reports of breastfed infant deaths in the literature.[2,3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kirschner RI, Jacobitz KL. Multiple fatalities following ingestion of sea turtle meat. Clin Toxicol 2011;49:571. doi:10.3109/15563650.2011.598695
2 Rasamimanana NG, Randrianandrasana JC, Andrianarimanana KD, et al. Chelonitoxism in breast-fed child: Cases in Mahajanga, Madagascar. Med Sante Trop 2017;27:329-32.28947412
3 Rasamimanana NG, Andrianirina ZZ, Razafilalaina FM, et al. Collective poisoning from sea turtle consumption in Mahajanga Madagascar, May 2014. Med Sante Trop 2017;27:56-61.28406418

## Substance Identification

### Substance Name

Chelonitoxin Poisoning

### Drug Class

Breast Feeding

Lactation

Milk, Human

Foodborne

Diseases Poisoning